# Green Tea

## Drug Levels and Effects

### Summary of Use during Lactation

Green tea (Camellia sinensis) leaves and stems contain caffeine, l-theanine, polyphenols (e.g., quercetin), and tannins. Fussiness, jitteriness and poor sleep patterns have been reported in the infants of mothers with extremely high caffeine intakes (see the LactMed record on caffeine for details). The excretion of l-theanine into breastmilk has not been studied. Giving tea directly to infants can interfere with iron absorption and cause anemia,[1] but anemia in breastfed infants has not been reported with maternal tea ingestion. Application of wet tea bags to the nipples has been studied as a method of reducing nipple pain during the first few days of nursing. Two small, moderately well-controlled studies found a positive effect of the tea bags, but warm water compresses were as at least as effective as tea bags.[2,3] No studies were found that examined the use of oral green tea extract, topical application of green tea extract to the nipples, or to the topical product Veregren applied to genital warts during breastfeeding. Topical products applied away from the breast should pose negligible risk for the breastfed infant. Green tea is reportedly used to increase milk supply by some mothers in Türkiye.[4]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Caffeine is excreted into breastmilk. Refer to the LactMed record on caffeine for details. No components of green tea besides caffeine have been measured in milk after the ingestion of tea, but some have been measured after the ingestion of other foods.

Maternal Levels. Quercetin can be found in breastmilk of mothers with normal diets.[5] Milk samples from 17 nursing mothers on uncontrolled diets were taken at 1, 4 and 13 weeks postpartum at times between 10 am and 1 pm. Average quercetin levels in breastmilk were 48 nmol/L at week 1, 60 nmol/L at week 4 and 51 nmol/L at week 13. Because of the uncontrolled diet and varying sampling times, the range of values among individuals was large.[6]

Quercetin was measured in the milk of 11 mothers after they received an onion soup that contained either 0.8 or 1 mg/kg of quercetin glucosides. A baseline milk sample was obtained after a 5-day low-quercetin diet, and 7 milk samples were obtained over the 48 hours following soup ingestion. Baseline total (from conjugated and unconjugated) quercetin in breastmilk averaged 45 nmol/L. An average peak milk quercetin level of 68 nmol/L was attained at an average of 11.9 hours after the soup meal. The average half-life of quercetin in breastmilk was 50.3 hours.[7]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Merhav H, Amitai Y, Palti H, et al. Tea drinking and microcytic anemia in infants. Am J Clin Nutr 1985;41:1210-3.4003328
2 Buchko BL, Pugh LC, Bishop BA, et al. Comfort measures in breastfeeding, primiparous women. J Obstet Gynecol Neonatal Nurs 1994;23:46-52.8176527
3 Lavergne NA. Does application of tea bags to sore nipples while breastfeeding provide effective relief? J Obstet Gynecol Neonatal Nurs 1997;26:53-8.9017547
4 Kaygusuz M, Gümüştakım RŞ, Kuş C, et al. TCM use in pregnant women and nursing mothers: A study from Turkey. Complement Ther Clin Pract 2021;42:101300.33412511
5 Williamson G, Clifford MN. A critical examination of human data for the biological activity of quercetin and its phase-2 conjugates. Crit Rev Food Sci Nutr 2025;65:1669-705.38189312
6 Song BJ, Jouni ZE, Ferruzzi MG. Assessment of phytochemical content in human milk during different stages of lactation. Nutrition 2013;29:195-202.23237648
7 Romaszko E, Wiczkowski W, Romaszko J, et al. Exposure of breastfed infants to quercetin after consumption of a single meal rich in quercetin by their mothers. Mol Nutr Food Res 2014;58:221-8.23963751

## Substance Identification

### Substance Name

Green Tea

### Scientific Name

Camellia sinensis

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Phytotherapy

Plants, Medicinal